# Benzocaine

CASRN: 94-09-7

## Drug Levels and Effects

### Summary of Use during Lactation

Topical benzocaine has not been studied during breastfeeding, but is unlikely to affect her breastfed infant if it is applied away from the breast. Benzocaine should not be applied to the breast or nipple, because the infant may ingest the drug during nursing and it has been associated with severe methemoglobinemia in children under 2 years of age.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lidocaine

### References

1 US Food and Drug Administration. Risk of serious and potentially fatal blood disorder prompts FDA action on oral over-the-counter benzocaine products used for teething and mouth pain and prescription local anesthetics. 2018. https://www.fda.gov/drugs/drug-safety-and-availability/risk-serious-and-potentially-fatal-blood-disorder-prompts-fda-action-oral-over-counter-benzocaine

## Substance Identification

### Substance Name

Benzocaine

### CAS Registry Number

94-09-7

### Drug Class

Breast Feeding

Lactation

Anesthetics, Local